# Influenza Vaccines

## Drug Levels and Effects

### Summary of Use during Lactation

The Centers for Disease Control and Prevention and several health professional organizations state that vaccines given to a nursing mother do not affect the safety of breastfeeding for mothers or infants and that breastfeeding is not a contraindication to either the live, attenuated (i.e., inhaled) or inactivated (i.e., injected) influenza vaccine, including H1N1 (swine) influenza vaccine. Immunization of the mother during pregnancy increases the amount of influenza antibodies and influenza-specific CD8 T cells in breastmilk and may offer added protection of their breastfed infants against influenza.[1-3] Breastmilk antibody responses are similar or higher with the inactivated injectable influenza vaccine than with the live intranasal vaccine, but the intranasal vaccine induces transfer of numerous immune factors into milk that the injectable vaccine does not.[4,5] However, milk antibody titers are not markedly boosted by seasonal influenza vaccines.[6] The combination of maternal influenza vaccination during breastfeeding and breastfeeding the infant can reduce infant influenza by about 60% compared to no vaccination. Breastfed infants should be vaccinated according to the routine recommended schedules.[7,8]

### Drug Levels

Maternal Levels. A randomized, double-blind study compared the effects of inactivated influenza vaccine (Fluzone, 2011-2012 strains) and live attenuated influenza vaccine (FluMist, 2012-2013 strains) in nursing mothers who were 28 to 120 days postpartum. A total of 248 women were included over two influenza seasons. No vaccine or wild-type influenza virus was detected in breastmilk of any of the women.[4]

Twenty-six nursing mothers collected milk samples just before and 2 weeks after receiving a seasonal influenza vaccine during the 2019-2020 and 2020-2021 flu seasons. Thirteen study participant milk sample pairs per influenza season were assessed for specific IgA, IgG, and secretory antibody (sAb) binding against each relevant HA strain included in either the 2019-2020 or 2020-2021 seasonal influenza vaccine. Across the 7 immunogens examined, as many as 54% of samples exhibited no sAb boost, and no significant differences were found in IgG- or IgA-mediated influenza neutralization activity between the prevaccination and post-vaccination timepoints.[6]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Limited data indicate that breastfeeding can enhance the response of the infant to certain vaccine antigens.[8,9]

In a study of pregnant women who were immunized during the third trimester and breastfed their infants for an average of 14 weeks, their infants had a 36% reduction in respiratory illness with fever, and a 63% reduction in laboratory-confirmed influenza during the first 6 months of life. However, the contribution of breastfeeding compared with passive transfer of maternal antibodies during pregnancy was not determined.[10]

A prospective, blinded trial in Bangladesh compared outcomes of mothers randomly assigned to receive either trivalent influenza vaccine or pneumococcal polysaccharide vaccine in the third trimester of pregnancy and their infants. Influenza-specific IgA levels were higher in the breastmilk of those immunized against influenza than pneumococcus until at least 6 months postpartum. The breastfed infants of influenza-vaccinated mothers had fewer episodes of respiratory illness with fever in the first 6 months postpartum, which was positively correlated with the extent of exclusive breastfeeding.[2]

A study compared the effects of inactivated influenza vaccine (Fluzone, 2011-2012 strains) and live attenuated influenza vaccine (FluMist, 2012-2013 strains) in nursing mothers who were 28 to 120 days postpartum. The breastfed infants whose mothers received the live attenuated strain had more fussiness (60%) than those whose mothers received the inactivated vaccine (45%).[4]

A retrospective medical record study of 44,132 mother-infant pairs found 141 infants had laboratory-confirmed influenza before 6 months of age. Breastfeeding alone without maternal vaccination did not reduce the risk of influenza, but mothers who were vaccinated during pregnancy and breastfed their infants had a 62% decreased risk of infant influenza. Breastfeeding enhanced the protection provided by maternal vaccination alone, which reduced the risk by 40%.[11]

### Effects on Lactation and Breastmilk

A randomized, double-blind study compared the effects of inactivated influenza vaccine (Fluzone, 2011-2012 strains) and live attenuated influenza vaccine (FluMist, 2012-2013 strains) in nursing mothers who were 28 to 120 days postpartum. A total of 248 women were included over two influenza seasons. Breastmilk IgG and IgA (H1N1 strain only), serum hemagglutination inhibition (HAI), and serum IgG responses were higher after the inactivated vaccine than after the live oral vaccine.[4]

Maternal milk and infant gastric and stool samples were collected from 20 premature-delivering mother-infant pairs ranging in gestational age at birth from 26 to 36 weeks in the neonatal intensive care unit. Samples were collected at 8 to 9 days and 21 to 22 days postpartum. Results were compared to the same infant samples when the infants were given donor milk. Gastric samples were collected 30 minutes after the end of the feeding. IgA antibodies to H1N1 hemagglutinin and H3N2 neuraminidase were 3.6- and 2-fold higher, respectively, in maternal milk than donor milk feeds given at 8–9 days of postnatal age but did not differ at 21–22 days. IgM antibodies to H1N1 hemagglutinin (10- and 3-fold) and H3N2 neuraminidase-specific IgM (13- and 8-fold) were higher in maternal milk than in donor milk feeds given at 8–9 days and 21–22 days of postnatal age, respectively. H1N1 hemagglutinin-specific IgG was 2-fold higher in maternal than donor milk feeds given at 8–9 days and 21–22 days of postnatal age. H3N2 neuraminidase-specific IgG was 30% higher in maternal milk than donor milk feeds given at 8–9 days but did not differ at 21–22 days. In gastric contents, H1N1 hemagglutinin-specific IgG was 2-fold higher in maternal milk than donor feeds given at 8–9 days and 21–22 days of postnatal age. H3N2 neuraminidase-specific IgG was 30% higher in maternal milk than donor milk feeds given at 8–9 days but did not differ at 21–22 days.[12]

A study of nursing mothers compared the immune responses generated in milk after either live attenuated influenza vaccination or injectable inactivated influenza vaccination. Both vaccines induced influenza-specific IgA that persisted in milk for at least 6 months. Regulation of type I interferon production, toll-like receptor, and pattern recognition receptor signaling pathways were highly upregulated in milk on day 1 following live-attenuated vaccine but not by the inactivated vaccine at any time point.[5]

In a preliminary study, milk samples were obtained from 16 women, 8 of whom had received the 2019-2020 influenza vaccination (brands not specified) and the others had not. The women who had been vaccinated had greater expression of gene cell markers of T-cell surface markers.[13]

### References

1 Maertens K, De Schutter S, Braeckman T, et al. Breastfeeding after maternal immunisation during pregnancy: Providing immunological protection to the newborn: A review. Vaccine 2014;32:1786–92.24530929
2 Schlaudecker EP, Steinhoff MC, Omer SB, et al. IgA and neutralizing antibodies to influenza A virus in human milk: A randomized trial of antenatal influenza immunization. PLoS One 2013;8:e70867.23967126
3 Hunagund S, Golan Y, Asiodu IV, et al. Effects of vaccination against influenza, pertussis, and COVID-19 on human milk antibodies: Current evidence and implications for health equity. Front Immunol 2022;13:910383.35903100
4 Brady RC, Jackson LA, Frey SE, et al. Randomized trial comparing the safety and antibody responses to live attenuated versus inactivated influenza vaccine when administered to breastfeeding women. Vaccine 2018;36:4663–71.29961606
5 Pannaraj PS, da Costa-Martins AG, Cerini C, et al. Molecular alterations in human milk in simulated maternal nasal mucosal infection with live attenuated influenza vaccination. Mucosal Immunol 2022;15:1040–7.35739193
6 Yang X, DeCarlo C, Fox A, et al. Assessment of human milk samples obtained pre and post-influenza vaccination reveals a poor boosting of seasonally-relevant, hemagglutinin-specific antibodies. Front Immunol 2023;14:1154782.37325620
7 Jamieson DJ, Munoz FM, Rasmussen SA. Maternal immunization. Obstet Gynecol 2026;147:661–78.41712936
8 Kroger A, Bahta L, Long S, et al. CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html
9 Pabst HF. Immunomodulation by breast-feeding. Pediatr Infect Dis J 1997;16:991–5.9380478
10 Zaman K, Roy E, Arifeen SE, et al. Effectiveness of maternal influenza immunization in mothers and infants. N Engl J Med 2008;359:1555–64.18799552
11 Rick AM, D'Agostino H, Liu H, et al. Protective effects of maternal influenza vaccine during pregnancy and breastfeeding on risk of infant influenza. Open Forum Infectious Diseases 2023;10:S26–S7.37274536
12 Demers-Mathieu V, Huston RK, Markell AM, et al. Antenatal influenza A-specific IgA, IgM, and IgG antibodies in mother's own breast milk and donor breast milk, and gastric contents and stools from preterm infants. Nutrients 2019;11:1567.31336756
13 Demers-Mathieu V, DaPra C, Medo E. Influenza vaccine associated with the gene expression of T cell surface markers in human milk. Breastfeed Med 2022;17:218–25.34870443

## Substance Identification

### Substance Name

Influenza Vaccines

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines